# Sertraline

CASRN: 79617-96-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of sertraline in breastmilk, amounts ingested by the infant are small and is usually not detected in the serum of the infant, although the weakly active metabolite norsertraline (desmethylsertraline) is often detectable in low levels in infant serum. Rarely, preterm infants with impaired metabolic activity might accumulate the drug and demonstrate symptoms similar to neonatal abstinence. No adverse effects on development have been found in infants followed for up to 5 years of age. Most authoritative reviewers consider sertraline a preferred antidepressants during breastfeeding.[1-9]

Mothers taking an SSRI during pregnancy and postpartum may have more difficulty breastfeeding, although this might be a reflection of their disease state.[10] These mothers may need additional breastfeeding support. Breastfed infants exposed to an SSRI during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[11,12]

### Drug Levels

Sertraline is metabolized to norsertraline (desmethylsertraline), which has antidepressant activity of about 10% that of sertraline.

Maternal Levels. In a pooled analysis of serum levels from published studies and 4 unpublished cases, the authors found that 15 mothers taking an average daily dosage of 83 mg (range 25 to 200 mg) had an average breastmilk sertraline level of 45 mcg/L (range 7 to 207 mcg/L).[1] Using the average dosage and milk level data from this paper, an exclusively breastfed infant would receive an estimated 0.5% of the maternal weight-adjusted dosage of sertraline.

Twenty-six women who were an average of 15.8 weeks postpartum (range 5 to 36 weeks) and receiving an average of 124 mg sertraline daily for at least 14 days for severe depression were studied while breastfeeding with extensive milk and serum sampling over a 24-hour period. All milk samples had detectable sertraline (average 129 mcg/L; range 11 to 938 mcg/L) and norsertraline (average 258 mcg/L; range 20 to 1498 mcg/L). Drug concentrations were higher in the hindmilk than the foremilk. Analysis of milk sertraline data from 15 mothers who submitted complete sets of milk samples indicated that the peak concentration of the drug and metabolite occurred 8 to 9 hours after a dose. In these women, the concentration in milk correlated with serum concentration, but not daily dosage. The authors estimated that an exclusively breastfed infant would receive an average of 0.54% of the maternal weight-adjusted dosage and that pumping and discarding milk 8 to 9 hours after the mother’s dose would decrease the infant’s daily dosage by 17%.[13]

From data in 6 mothers who were 5 to 34 weeks postpartum and taking sertraline in an average daily dosage of 64 mg (range 50 to 100 mg), the authors estimated that an exclusively breastfed infant would receive 0.9% of the maternal weight-adjusted dosage.[14]

At 2 months postpartum, 4 mothers taking an average of 87.5 mg of sertraline daily had average milk levels of 26.4 mcg/L of sertraline and 29 mcg/L of norsertraline at random times after the previous dose. The authors estimated that an exclusively breastfed infant would receive 0.04 mg/kg of sertraline daily.[15]

The mother of a preterm infant was taking sertraline 150 mg daily during pregnancy and postpartum. Her breastmilk levels of sertraline and norsertraline on 3 days at random times averaged 201 and 358 mcg/L, respectively.[16]

One woman taking sertraline 25 mg daily had an average breastmilk sertraline concentration of 29 mcg/L at two times that were not stated. These values equated to an average infant dosage of 4.4 mcg/kg daily or 0.6% of the maternal weight-adjusted dosage. In the same paper, 3 women taking sertraline 50 mg daily had an average breastmilk sertraline concentration of 58 mcg/L at times that were not stated. These values equated to an average infant dosage of 8.7 mcg/kg daily or 1.2% of the maternal weight-adjusted dosage.[17]

A nursing mother was taking sertraline 50 mg daily. Foremilk and hindmilk samples taken at 4 weeks postpartum, 13 hours after a dose contained 26 mcg/L and 46 mcg/L, respectively.[18]

Nine women treated with sertraline 25 to 75 mg daily (7 were taking 50 mg daily) during the third trimester of pregnancy and during breastfeeding provided trough milk samples during the first week postpartum. Sertraline was undetectable (<5 mcg/L) in the milk of 1 woman taking 50 mg daily. In the other 8 women, milk levels ranged from 11.1 to 24.5 mcg/L, with calculated weight-adjusted percentage of maternal dosages ranging from 0.2 to 2.4%. These values might be inaccurate because of the timing of milk sample collection.[19]

Random milk samples were obtained from 6 women taking a median dosage of 50 mg (range 25 to 50 mg) of sertraline daily had a median sertraline milk concentration of 11.3 mcg/L (range 3.6 to 35.7 mcg/L). The authors calculated that this represents a median infant dosage of 1.6 (range 0.5 to 5.4) mcg/kg daily. No correlation was found between maternal dosage and milk sertraline level.[20]

Fifteen mothers taking sertraline in an average dosage of 83 mg daily (range 50 to 200 mg daily) provided milk samples for analysis. Samples of milk from the complete emptying of one breast were collected 3 times over a 2-day period at predefined times between just before a dose and 14 hours after a dose, with each participant collecting samples at different times. The average milk concentration was 87 mcg/L (range 12 to 288 mcg/L) resulting in an average infant daily dosage of 10 mcg/kg and a relative infant dosage of 1%.[21]

Thirty-eight mothers taking sertraline with a median daily dose of 50 mg (range 25 to 150 mg) provided 35 blood samples at week 1 postpartum, and 20 at weeks 4 to 6 postpartum. These women also provided 107 breast milk samples, 67 of which were collected at week 1 and 40 at week 4 postpartum. One maternal blood sample was collected and paired with a foremilk and a hindmilk sample. The lower limit of quantification for sertraline was established at 1 mcg/L in plasma and 5 mcg/L in breast milk. These data were used to create a population pharmacokinetic model using NONMEM, which was then used to simulate serum and milk levels in 2000 patients. Simulations suggested a median daily infant dosage of 6.9 mcg/kg with a 50 mg maternal daily dose, representing a relative infant dose of 0.95% of the weight-adjusted maternal dose. The authors found that 100% of simulated infants at maternal doses of 150 mg daily would ingest less than 0.13 mg/kg daily of sertraline, which represents a total of less than 150 mg over 6 months of exclusive breastfeeding.[22] The measurement of fat content in the study may not have been accurate.[23]

A woman taking sertraline 100 mg daily provided 5 milk samples between 3.1 and 5.2 days postpartum. Sertraline concentrations ranged from 53.4 mcg/L at 6 hours after a dose to 15.5 mcg/L at 24 hours after a dose.[24]

Infant Levels. A paper reported 3 breastfed infants whose mother were taking sertraline. A woman taking 50 mg daily increased her dose to 75 mg daily after 2 weeks. Sertraline and norsertraline were undetectable (<2 mg/L) in her 4-week-old infant’s serum. Another infant whose mother was taking 75 mg daily which was increased to 100 mg daily had detectable norsertraline (<2 mg/L), but no sertraline (<1 mg/L). A third woman taking 75 mg daily found no detectable sertraline or norsertraline in her infant’s serum at 8 weeks of age. The extent of nursing was not reported in any of the cases.[25]

Of 30 breastfed infants (19 exclusively, 11 breastfed 50% or more) aged 6 to 13 weeks, 22 had undetectable (<1 mcg/L) sertraline serum levels during maternal therapy with sertraline dosages of 25 to 200 mg daily. Of the 8 infants who had detectable serum levels, their average sertraline serum level was 7.9 mcg/L. Their mothers, who were taking an average of 109 mg daily, had an average serum level of 52.8 mcg/L.[26]

In a pooled analysis of 53 mother-infant pairs from published and unpublished cases, the authors found that infants had an average of 2% (range 0 to 15%) of the sertraline plasma concentrations of the mothers’; 3 of the infants had a plasma level greater than 10% of the mothers’, which was considered by the authors as being elevated.[1]

Twenty-two breastfed (20 exclusively) infants with an average age of 16.6 weeks (range 4 to 28 weeks) whose mothers were receiving an average of 124 mg sertraline daily for at least 14 days for severe depression were studied. Infant serum levels were measured 2.2 hours (range 0.5 to 5 hours) after nursing. Four infants had detectable sertraline (>2 mcg/L) and 11 infants had detectable norsertraline in their serum with an average concentration of 22 mcg/L. One 11-week-old infant who was being treated for acute asthma with albuterol, inhaled corticosteroids and hydroxyzine had serum levels higher than its mother’s, even though 4 other infants received higher doses of sertraline and norsertraline through milk.[13]

In 6 breastfed (extent not stated) infants aged 5 to 34 weeks whose mothers were taking sertraline in an average daily dosage of 15 mg (range 5 to 34 mg), sertraline and norsertraline were undetectable (<3.4 mcg/L).[14]

In a study of mothers given sertraline prophylactically for recurrent postpartum depression, 7 opted to breastfeed. Infant serum was tested at 4 weeks of age with a maternal dosage of 50 mg daily. Sertraline (<2 mcg/L) and norsertraline (<12 mcg/L) were undetectable in the serum of any infant.[27]

In a study comparing sertraline to nortriptyline for postpartum depression, 13 infants were breastfed by mothers taking sertraline (dosage and extent of nursing were not stated). After a constant maternal sertraline dosage for at least 14 days, infants had their serum concentrations measured. The infants were an average of 5.9 weeks old at the time of serum sampling. Sertraline was not detectable (<2 mcg/L) in any of the infants’ serum; norsertraline serum levels ranged from undetectable (<2 mcg/L) to 6 mcg/L.[28]

At 2 months postpartum, the breastfed infants of 4 mothers taking an average of 87.5 mg of sertraline daily had undetectable (<0.1 mcg/L) serum levels of sertraline and norsertraline.[15]

A 33-week preterm infant was exclusively breastfed by a mother who was taking sertraline 150 mg daily during gestation, at delivery and postpartum. Because of symptoms similar to neonatal abstinence syndrome, the infant’s serum concentrations of sertraline and desmethylsertraline were measured on day 5 postpartum. Levels were 13 and 52 mcg/L, respectively. Because of ongoing symptoms, breastfeeding was stopped on day 9 and the infant’s serum levels reportedly dropped, although specific values were not presented in the paper. The infant was later found to have genetically intermediate metabolism of two of the CYP450 enzymes involved in sertraline metabolism.[16]

Authors of a meta-analysis on sertraline reported infant serum levels of sertraline and norsertraline in 25 infants who were breastfed by mothers taking sertraline. Ten of the infants were exclusively breastfed, two were 80% breastfed and the breastfeeding status of the others was not reported. Only two infants, both exclusively breastfed, had detectable serum sertraline levels of 2.1 and 2.4 mcg/L. The other infants had undetectable (<2 mcg/L) sertraline levels. Four other infants had detectable norsertraline levels ranging from 2.6 to 4.7 mcg/L. Sampling times were not reported.[6]

Fifteen breastfed (extent not stated) infants with an average age of 1.4 months (range 1.0 to 2.6 months) whose mothers were taking an average sertraline dosage of 83 mg daily (range 50 to 200 mg daily) had one blood sample taken for analysis. Their average serum level of sertraline was <2 mcg/L (range <2 to 2.6 mcg/L).[21]

### Effects in Breastfed Infants

Benign neonatal sleep myoclonus occurred in one 4-month-old infant and agitation that spontaneously resolved whose mother was taking sertraline 75 mg daily.[25]

None of 26 infants with an average age of 16.6 weeks (range 4 to 28 weeks) whose mothers were receiving an average of 124 mg sertraline daily had any detectable acute adverse reactions to sertraline in breastmilk. All had been breastfeeding for at least 3 weeks.[13]

Whole blood serotonin levels were measured in 14 mothers and their breastfed infants after 6 to 16 weeks of sertraline therapy. Maternal dosages ranged from 25 to 200 mg daily. Although maternal serotonin levels were decreased from 159 mcg/L to 19 mcg/L by sertraline therapy, infant serotonin levels averaged 227 mcg/L before and 224 mcg/L after maternal therapy. The authors concluded that these findings indicate that the amount of sertraline ingested by the infants was not sufficient to affect platelet serotonin uptake in breastfed infants. Platelets and neurons both have the same serotonin transporter, so this lack of effect was seen as indirect evidence of safety of sertraline use during breastfeeding. None of the infants experienced any adverse effects from sertraline in breastmilk, including 6 exclusively breastfed infants under 3 months of age.[29]

Twenty-five mothers who took an average sertraline dosage of 82.4 mg daily breastfed their infants exclusively for 4 months and breastfed at least 50% during months 5 and 6. Their infants had 6-month weight gains that were normal according to national growth standards and the mothers reported no abnormal effects in their infants.[30]

In 6 infants aged 5 to 34 weeks whose mothers were taking sertraline 50 to 100 mg daily, no adverse reactions were noted clinically at the time of the study.[14]

No adverse effects were seen in 7 infants who were 4 weeks old and whose mothers had been taking sertraline 50 mg daily since day 4 postpartum.[27]

One study of side effects of SSRI antidepressants in nursing mothers found no adverse reactions that required medical attention among 2 infants whose mother was taking sertraline. No specific information on maternal sertraline dosage, extent of breastfeeding or infant age was reported.[31]

A small study compared the reaction to pain in infants of depressed mothers who had taken an SSRI during pregnancy alone or during pregnancy and nursing, to a control group of unexposed infants of nondepressed mothers. Infants exposed to an SSRI either prenatally alone or prenatally and postnatally via breastmilk had blunted responses to pain compared to control infants. Four of the 30 infants were exposed to sertraline. Because there was no control group of depressed, nonmedicated mothers, an effect due to maternal behavior caused by depression could not be ruled out. The authors stressed that these findings did not warrant avoiding drug treatment of depression during pregnancy or avoiding breastfeeding during SSRI treatment.[15]

An uncontrolled online survey compiled data on 930 mothers who nursed their infants while taking an antidepressant. Infant drug discontinuation symptoms (e.g., irritability, low body temperature, uncontrollable crying, eating and sleeping disorders) were reported in about 10% of infants. Mothers who took antidepressants only during breastfeeding were much less likely to notice symptoms of drug discontinuation in their infants than those who took the drug in pregnancy and lactation.[32]

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. One mother who was taking sertraline 50 mg daily, zopiclone 2.5 mg about every 3 days as needed, and also took alprazolam 0.25 mg on 2 occasions, reported sedation in her breastfed infant.[33]

A mother was taking sertraline 150 mg daily during gestation, at delivery and postpartum while exclusively breastfeeding her infant. Her preterm infant born by cesarean section at 33 weeks gestation developed hyperthermia, muscle tone regulation disorders, and high-pitched crying during the first 24 hours after birth. The symptoms worsened on the 4th day of life, but breastfeeding was continued. On day 5, the infant had serum concentrations of sertraline and its metabolite that are in the reported therapeutic range in adults. Breastfeeding was discontinued on day 9 postpartum and the infant’s symptoms dissipated, serum drug levels decreased, and the infant thrived over several months. The infant was later found to have genetically intermediate metabolism of two of the CYP450 enzymes involved in sertraline metabolism. The authors attributed the infant’s symptoms to serotonergic overstimulation caused by persistently high sertraline levels from breastfeeding and reduced metabolism.[16] The reaction was probably caused by sertraline.

An infant was being breastfed (extent not stated) by a mother who began taking sertraline 50 mg daily and methylphenidate after 5 weeks postpartum. Dosage was started at 10 mg daily with an immediate-release product and gradually increased to 72 mg daily of an extended-release product. At 14 weeks of age, the infant was developing normally with no feeding difficulties. Examinations at 6 months and 1 year of age found no developmental problems in the child.[34]

In a study of sertraline for postpartum depression, 11 women completed the full 7-week duration of the study out of 36 who were entered. Six mothers reported breastfeeding their infants (extent not stated) and 5 did not breastfeed their infants. The average sertraline dose in week 7 was 100 mg daily. No side effects were reported for any of the infants in the sertraline or placebo groups at this time.[35]

Authors of a meta-analysis on sertraline reported 25 infants who were breastfed by mothers taking sertraline. Ten of the infants were exclusively breastfed, two were 80% breastfed and the breastfeeding status of the others was not reported. No adverse reactions occurred.[6]

A cohort of 247 infants exposed to an antidepressant in utero during the third trimester of pregnancy were assessed for poor neonatal adaptation (PNA). Of the 247 infants, 154 developed PNA. Infants who were exclusively given formula had about 3 times the risk of developing PNA as those who were exclusively or partially breastfed. Sixty-eight of the infants were exposed to sertraline in utero.[36]

A retrospective study of 30 nursing mothers who had been seen at a psychiatric outpatient facility, followed for at least 8 weeks, and prescribed sertraline found that adverse effects were reported in 5 (13%) of their infants. One mother was taking 25 mg daily; 3 mothers were taking 50 mg daily and 1 was taking 100 mg daily. The most commonly reported adverse events in the infants were insomnia and restlessness; constant crying and poor feeding were less commonly reported. All of the adverse effects developed within the first 2 weeks after initiation of maternal treatment and disappeared within the 3 days after drug discontinuation. Adverse effects failed to disappear in one infant after reducing the maternal dosage from 50 mg daily to 25 mg daily. There was no difference in prevalence of adverse effects between these infants and those in the same study whose mothers were prescribed paroxetine.[37]

A 12-day-old exclusively breastfed male infant presented with severe weight loss and hypernatremic dehydration because of inadequate milk intake and a 30% weight loss since birth. The infant’s mother was being treated for bipolar disorder with lamotrigine 250 mg orally once daily, aripiprazole 15 mg orally once daily, and sertraline 100 mg orally once daily. She was also taking levothyroxine 50 mcg once daily, a prenatal multivitamin, and folic acid. On initial evaluation in the emergency department, he was pale, with marbled skin, dry mucous membranes, decreased skin turgor, and bluish feet with prolonged capillary refill. The right foot eventually became darker with blackened toes, and he developed gangrene of the right lower limb, which did not respond to medical therapy and required amputation of all five toes and surgical debridement of the metatarsals. Necrosis was attributed to arterial microthrombi caused by disseminated intravascular coagulation after severe dehydration. The authors considered the mother’s medications as a possible cause of the dehydration and related problems.[38]

A mother who was exclusively breastfeeding a 2-month-old infant began taking sertraline 50 mg daily for depression. Six days later, restlessness and a dramatic decrease in the duration of sleep in the baby was reported. Sertraline was discontinued and the symptoms completely resolved within 3 days. No abnormalities were seen on physical examination or laboratory tests. The infant subsequently developed severe constipation with maternal paroxetine use, but tolerated maternal citalopram use.[39]

A mother who was 3 months postpartum was treated for depression with sertraline 50 mg in the morning and olanzapine 1.25 mg at night at night for sleep. After 2 weeks, the sertraline dosage was increased to 25 mg in the morning and 50 mg at night. Five days after the dosage increase, her breastfed infant began having diarrhea about 15 minutes after each feeding. She continued the medication and provided oral rehydration solution to the infant. The diarrhea resolved after 2 weeks. The diarrhea was probably caused by sertraline in breastmilk.[40]

Nine women treated with sertraline 25 to 75 mg daily (7 were taking 50 mg daily) during the third trimester of pregnancy and during breastfeeding. Pediatric evaluations including neurologic assessments and brain ultrasound were conducted during the first 24 hours postpartum. Further follow-up was conducted at 6 or more months of age. Infant clinical status was comparable to unexposed infants from the same pediatric department.[19]

A case-control study in Israel compared 280 infants of nursing mothers taking long-term psychotropic drugs to the infants of 152 women taking antibiotics. Infant sleepiness at 3 days of age was reported by 1 mother taking sertraline during pregnancy and breastfeeding and by none taking antibiotics. The sleepiness resolved within 24 hours with no developmental effect.[41]

A prospective study of nursing mothers who called to a lactation service in Poland found 4 with sertraline-induced adverse effects in breastfed infants. These included 3 with infant colic that were rated possible and one probable case of sinus tachycardia in a 3-week-old exclusively breastfed infant whose mother was taking 50 mg daily.[42]

In a retrospective cohort study of 5,079 newborns whose mothers took an SSRI during pregnancy, 1.5% of breastfed newborns had neonatal withdrawal compared with 2.3% among the formula-fed newborns, although this did not reach statistical significance. Breastfed newborns had a reduced risk of transfer to the NICU than formula-fed newborns; however, this finding did not persist in sensitivity analysis. Thirty percent of women in the study were taking sertraline.[43] A further analysis of these data indicated that infants of mothers who took a SSRI during pregnancy and exclusively breastfed had a greater risk of an emergency department visit or readmission to the hospital, primarily due to jaundice.[12]

A mother was taking sertraline and levothyroxine. She reported that her 2.5-month-old infant who was exclusively breastfed experienced a rash. The reaction was rated as possible or probable, but relatively mild.[44]

A secondary analysis of a population study evaluated infant IQ scores with SSRI use postpartum during nursing (n = 22), non-SSRI exposed breastfed infants (n = 37), and non-breastfed infants (n = 38). Of the entire group of mothers, 81 mothers were treated with fluoxetine, 9 with sertraline, 8 with paroxetine, and 2 with citalopram. Children had IQ testing at a mean age of 4.9 years. There were no significant differences in any adjusted mean IQ scores between breastfed children with and without postnatal SSRI exposure.[45]

A pilot study compared the stool of breastfed infants whose mothers were taking an SSRI antidepressant to those of infants whose mothers were not taking an SSRI. Six of the 10 women taking an SSRI were taking sertraline. The stools of infants exposed to an SSRI in milk had increases in the genera Gemella, Staphylococcus and Corynebacterium and a decrease in Lactobacillus.[46]

### Effects on Lactation and Breastmilk

Sertraline has caused galactorrhea in nonpregnant, nonbreastfeeding patients, sometimes with normal serum prolactin.[47-53] However, in a study of cases of hyperprolactinemia and its symptoms (e.g., gynecomastia) reported to a French pharmacovigilance center, sertraline was not found to have an increased risk of causing hyperprolactinemia compared to other drugs.[54] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A midwife observed 6 patients who reported a decrease in milk supply after starting sertraline (dosages not reported). One of the mothers had been taking sertraline since the 6th month of pregnancy. She reported an increase in milk supply when she stopped sertraline for one week at 4 months postpartum. When she restarted sertraline, her milk supply reportedly decreased. In all of the women, the milk supply increased in 2 to 3 days after increasing fluid and the frequency of nursing.[55]

In a small prospective study, 8 primiparous women who were taking a serotonin reuptake inhibitor (SRI; 3 taking fluoxetine and 1 each taking citalopram, duloxetine, escitalopram, paroxetine or sertraline) were compared to 423 mothers who were not taking an SRI. Mothers taking an SRI had an onset of milk secretory activation (lactogenesis II) that was delayed by an average of 16.7 hours compared to controls (85.8 hours postpartum in the SRI-treated mothers and 69.1 h in the untreated mothers), which doubled the risk of delayed feeding behavior in the untreated group. However, the delay in lactogenesis II may not be clinically important, since there was no statistically significant difference between the groups in the percentage of mothers experiencing feeding difficulties after day 4 postpartum.[56]

A case control study compared the rate of predominant breastfeeding at 2 weeks postpartum in mothers who took an SSRI antidepressant throughout pregnancy and at delivery (n = 167) or an SSRI during pregnancy only (n = 117) to a control group of mothers who took no antidepressants (n = 182). Among the two groups who had taken an SSRI, 33 took citalopram, 18 took escitalopram, 63 took fluoxetine, 2 took fluvoxamine, 78 took paroxetine, and 87 took sertraline. Among the women who took an SSRI, the breastfeeding rate at 2 weeks postpartum was 27% to 33% lower than mother who did not take antidepressants, with no statistical difference in breastfeeding rates between the SSRI-exposed groups.[57]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[58] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575; sertraline n = 200) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[59]

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[60]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine

### References

1 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
2 The Academy of Breastfeeding Medicine Protocol Committee. ABM clinical protocol #18: Use of antidepressants in nursing mothers. Breastfeed Med 2008;3:44-52.18333769
3 Berle JO, Spigset O. Antidepressant use during breastfeeding. Curr Womens Health Rev 2011;7:28-34.22299006
4 Larsen ER, Damkier P, Pedersen LH, . Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1-28.
5 Orsolini L, Bellantuono C. Serotonin reuptake inhibitors and breastfeeding: A systematic review. Hum Psychopharmacol 2015;30:4-20.25572308
6 Pinheiro E, Bogen DL, Hoxha D, . Sertraline and breastfeeding: Review and meta-analysis. Arch Womens Ment Health 2015;18:139-46.25589155
7 McAllister-Williams RH, Baldwin DS, Cantwell R, . British Association for Psychopharmacology consensus guidance on the use of psychotropic medication preconception, in pregnancy and postpartum 2017. J Psychopharmacol 2017;31:519-52.28440103
8 Molenaar NM, Kamperman AM, Boyce P, . Guidelines on treatment of perinatal depression with antidepressants: An international review. Aust N Z J Psychiatry 2018;52:320-27.29506399
9 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
10 Grzeskowiak LE, Leggett C, Costi L, . Impact of serotonin reuptake inhibitor use on breast milk supply in mothers of preterm infants: A retrospective cohort study. Br J Clin Pharmacol 2018;84:1373-9.29522259
11 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
12 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among Neonates With In-utero SSRI Exposure (NeoWISE): a retrospective cohort study. BMJ Paediatr Open 2026;10
13 Stowe ZN, Stowe MD, Hostetter AL, . The pharmacokinetics of sertraline excretion into human breast milk: Determinants of infant serum concentrations. J Clin Psychiatry 2003;64:73-80.12590627
14 Berle JØ, Steen VM, Aamo TO, . Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
15 Oberlander TF, Grunau RE, Fitzgerald C, . Pain reactivity in 2-month-old infants after prenatal and postnatal serotonin reuptake inhibitor medication exposure. Pediatrics 2005;115:411-25.15687451
16 Müller MJ, Preuß C, Paul T, . Serotonergic overstimulation in a preterm infant after sertraline intake via breastmilk. Breastfeed Med 2013;8:327-9.23249132
17 Salazar FR, D’Avila FB, de Oliveira MH, . Development and validation of a bioanalytical method for five antidepressants in human milk by LC-MS. J Pharm Biomed Anal 2016;129:502-8.27497651
18 Weisskopf E, Panchaud A, Nguyen KA, . Simultaneous determination of selective serotonin reuptake inhibitors and their main metabolites in human breast milk by liquid chromatography-electrospray mass spectrometry. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1057:101-9.
19 Pogliani L, Baldelli S, Cattaneo D, . Selective serotonin reuptake inhibitors passage into human milk of lactating women. J Matern Fetal Neonatal Med 2019;32:3020-5.29557689
20 Schoretsanitis G, Augustin M, Sassmannshausen H, . Antidepressants in breast milk; Comparative analysis of excretion ratios. Arch Womens Ment Health 2019;22:383-90.30116895
21 Den Besten-Bertholee D, Touw DJ, Damer EA, . Sertraline, citalopram and paroxetine in lactation: Passage into breastmilk and infant exposure. Front Pharmacol 2024;15:1414677.38841362
22 Monfort A, Cardoso E, Eap CB, . A population pharmacokinetic model for sertraline in women during the perinatal period-A contribution from the ConcePTION project. Br J Clin Pharmacol 2024;90:2849-60.39030897
23 Krutsch K. Manufacturer-documented infrared interference from SSRIs: A confound in breast milk fat and pharmacokinetic studies re: (1) Monfort A., et al. Br J Clin Pharmacol. 2024;90(11):2849-2860. (2) Weisskopf E, et al. Br J Clin Pharmacol. 2020;86:1642-1653. Br J Clin Pharmacol 2026;92:2423-4.41919320
24 Saito J, Miura R, Sandaiji N, . Transfer of bromazepam to cord blood and breast milk: A case series of bromazepam serum levels and outcomes in newborns and breastfed infants. J Hum Lact 2026;42:485-91.41871204
25 Mammen OK, Perel JM, Rudolph G, . Sertraline and norsertraline levels in three breastfed infants. J Clin Psychiatry 1997;58:100-3.9108810
26 Hendrick V, Fukuchi A, Altshuler L, . Use of sertraline, paroxetine and fluvoxamine by nursing women. Br J Psychiatry 2001;179:163-6.11483479
27 Sunder KR, Wisner KL, Hanusa BH, . Postpartum depression recurrence versus discontinuation syndrome: Observations from a randomized controlled trial. J Clin Psychiatry 2004;65:1266-8.15367055
28 Wisner KL, Hanusa BH, Perel JM, . Postpartum depression: A randomized trial of sertraline versus nortriptyline. J Clin Psychopharmacol 2006;26:353-60.16855451
29 Epperson N, Czarkowski KA, Ward-O’Brien D, . Maternal sertraline treatment and serotonin transport in breast-feeding mother-infant pairs. Am J Psychiatry 2001;158:1631-7.11578995
30 Hendrick V, Smith LM, Hwang S, . Weight gain in breastfed infants of mothers taking antidepressant medications. J Clin Psychiatry 2003;64:410-2.12716242
31 Lee A, Woo J, Ito S. Frequency of infant adverse events that are associated with citalopram use during breast-feeding. Am J Obstet Gynecol 2004;190:218-21.14749663
32 Hale TW, Kendall-Tackett K, Cong Z, . Discontinuation syndrome in newborns whose mothers took antidepressants while pregnant or breastfeeding. Breastfeed Med 2010;5:283-8.20807106
33 Kelly LE, Poon S, Madadi P, . Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448-51.22504099
34 Bolea-Alamanac BM, Green A, Verma G, . Methylphenidate use in pregnancy and lactation: A systematic review of evidence. Br J Clin Pharmacol 2014;77:96-101.23593966
35 Hantsoo L, Ward-O’Brien D, Czarkowski KA, . A randomized, placebo-controlled, double-blind trial of sertraline for postpartum depression. Psychopharmacology (Berl) 2014;231:939-48.24173623
36 Kieviet N, Hoppenbrouwers C, Dolman KM, . Risk factors for poor neonatal adaptation after exposure to antidepressants in utero. Acta Paediatr 2015;104:384-91.25559357
37 Uguz F, Arpaci N. Short-term safety of paroxetine and sertraline in breastfed infants: A retrospective cohort study from a university hospital. Breastfeed Med 2016;11:487-9.27575664
38 Morin C, Chevalier I. Severe hypernatremic dehydration and lower limb gangrene in an infant exposed to lamotrigine, aripiprazole, and sertraline in breast milk. Breastfeed Med 2017;12:377-80.28481632
39 Uguz F. Better tolerance of citalopram in a breastfed infant who could not tolerate sertraline and paroxetine. Breastfeed Med 2018;13:89-90.29185803
40 Uvais NA. Self-limiting diarrhea in an infant exposed to sertraline in breast milk. J Family Med Prim Care 2017;6:876-7.29564284
41 Kronenfeld N, Ziv Baran, T, Berlin M, . Chronic use of psychotropic medications in breastfeeding women: Is it safe? PLoS One 2018;13:e0197196.29782546
42 Morze K, Szałek E, Waszyk-Nowaczyk M. Drug-related problems among breastfeeding patients treated for depressive spectrum disorders. Front Pharmacol 2024;15:1440681.39108757
43 Cantin C, Li W, Snelgrove-Clarke E, . Neonates With In-Utero SSRI Exposure (NeoWISE): A retrospective cohort study examining the effect of newborn feeding method on newborn withdrawal. Int J Popul Data Sci 2024;9:2458.39679336
44 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105
45 Heinonen EW, Kao K, Mattson SN, . Cognitive outcomes of children exposed to selective serotonin reuptake inhibitors through breast milk. JAMA Netw Open 2025;8:e2544989.41269692
46 Desorcy-Scherer K, McNamara K, Luellwitz R, . Early insights into maternal antidepressant use and the human infant gut microbiome. Biol Res Nurs 2026;28:406-17.41652998
47 Lesaca TG. Sertraline and galactorrhea. J Clin Psychopharmacol 1996;16:333-4.
48 Bronzo MR, Stahl SM. Galactorrhea induced by sertraline. Am J Psychiatry 1993;150:1269-70.
49 Nebhinani N. Sertraline-induced galactorrhea: case report and review of cases reported with other SSRIs. Gen Hosp Psychiatry 2013;35:576.e3-5.
50 Suthar N, Pareek V, Nebhinani N, . Galactorrhea with antidepressants: A case series. Indian J Psychiatry 2018;60:145-6.29736080
51 Luo T, Liu QS, Yang YJ, . Aripiprazole for the treatment of duloxetine-induced hyperprolactinemia: A case report. J Affect Disord 2019;250:330-2.30875676
52 Moussaoui J, Barrimi M. Sertraline-induced galactorrhoea: A case report. Cureus 2024;16:e62357.39006722
53 Karan, Ira, Prinka. A rare case of sertraline induced galactorrhea with normoprolactinemia. Indian J Psychiatry 2024;66:S190. doi:10.4103/0019-5545.394305
54 Trenque T, Herlem E, Auriche P, . Serotonin reuptake inhibitors and hyperprolactinaemia: A case/non-case study in the French pharmacovigilance database. Drug Saf 2011;34:1161-6.22077504
55 Holland D. An observation of the effect of sertraline on breast milk supply. Aust N Z J Psychiatry 2000;34:1032.
56 Marshall AM, Nommsen-Rivers LA, Hernandez LL, . Serotonin transport and metabolism in the mammary gland modulates secretory activation and involution. J Clin Endocrinol Metab 2010;95:837-46.19965920
57 Gorman JR, Kao K, Chambers CD. Breastfeeding among women exposed to antidepressants during pregnancy. J Hum Lact 2012;28:181-8.22344850
58 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
59 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
60 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Sertraline

### CAS Registry Number

79617-96-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors